# Tagraxofusp

CASRN: 2055491-00-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of tagraxofusp during breastfeeding. The manufacturer recommends that breastfeeding be discontinued during tagraxofusp therapy and for 1 week after the final dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Tagraxofusp

### CAS Registry Number

2055491-00-2

### Drug Class

Breastfeeding

Lactation

Milk, Human

Antineoplastic Agents

Recombinant Fusion Proteins